# Maribavir

CASRN: 176161-24-3

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of maribavir during breastfeeding. Because maribavir is 98% bound to plasma proteins, the amount in milk is likely to be low. If a mother requires maribavir, it is not a reason to discontinue breastfeeding. Until more data become available, maribavir should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Maribavir

### CAS Registry Number

176161-24-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents